# Belladonna

CASRN: 8007-93-0

## Drug Levels and Effects

### Summary of Use during Lactation

Belladonna (Atropa belladonna) contains anticholinergic alkaloids such as atropine and scopolamine. Belladonna has been used in the past for headache, airway obstruction, and irritable bowel syndrome among others, but its use has been supplanted by more specific and less toxic compounds. Long-term use of belladonna might reduce milk production by reducing serum prolactin.[1] Application of belladonna paste to the nipple to reduce milk secretion during lactation is an extremely old use.[2] However, it is still used this way in rural India for treating breast abscesses and may have contributed to cases of breast gangrene.[3] Because of the narrow therapeutic index and variable potency of plant-based (i.e., nonstandardized) belladonna, it should be avoided orally and topically during lactation. Homeopathic products are not likely to interfere with breastfeeding or cause toxicity.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Specific published information in nursing mothers was not found as of the revision date. Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[4-8] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[1] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Masala A, Alagna S, Devilla L, et al. (1982). Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest.
2 Hughes R. Cases illustrative of the influence of belladonna. Br Med J 1860;s4-1 (193):706-7. PMC2252955
3 Wani I, Bakshi I, Parray FQ, et al. (2011). Breast gangrene. World J Emerg Surg.
4 Aaron DK, Ely DG, Deweese WP, et al. (1997). Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci.
5 Powell MR, Keisler DH. (1995). A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci.
6 Daniel JA, Thomas MG, Powell MR, et al. (1997). Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci.
7 Bizzarro A, Iannucci F, Tolino A, et al. (1980). Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol.
8 Svennersten K, Nelson L, Juvnäs-Moberg K. (1992). Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand.

## Substance Identification

### Substance Name

Belladonna

### CAS Registry Number

8007-93-0

### Drug Class

Breast Feeding

Lactation

Mydriatics

Parasympatholytics

Muscarinic Antagonists

Complementary Therapies

Phytotherapy

Plants, Medicinal